# Brexucabtagene Autoleucel

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of brexucabtagene autoleucel during breastfeeding nor on breastfeeding after CAR-T cell therapy with brexucabtagene autoleucel. However, some information on other agents indicates that breastfeeding might be acceptable after CAR-T cell therapy. If breastfeeding is attempted following brexucabtagene autoleucel CAR T-cell therapy, infants should be monitored carefully, particularly with B- and T-cell counts and immunoglobulin (IgA, IgG and IgM) blood levels.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Axicabtagene Ciloleucel

## Substance Identification

### Substance Name

Brexucabtagene Autoleucel

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunotherapy, Adoptive

Antineoplastic Agents

Genetic Therapy